# Perampanel

CASRN: 380917-97-5

## Drug Levels and Effects

### Summary of Use during Lactation

A minimal amount of information indicates that perampanel milk levels are quite low. If perampanel is required by the mother, it is not a reason to discontinue breastfeeding, but monitor the infant for drowsiness, agitation, adequate weight gain, and developmental milestones, especially in younger, exclusively breastfed infants and when using combinations of drugs.

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. A mother was taking perampanel 8 mg daily as well as lacosamide 200 mg twice daily and brivaracetam 100 mg twice daily. Her milk perampanel levels were 0.31 micromoles/L (108 mcg/L) on day 5 postpartum 12 hours after the previous dose and 0.15 micromoles/L (52 mcg/L) on week 5 postpartum 13 hours after the previous dose.[1]

Two breastfeeding women who were taking perampanel 4 mg daily plus lamotrigine had perampanel levels measured in their milk. One woman had a milk level of 0.06 mg/L at 3 days postpartum. The other woman had an undetectable (<0.01 mg/L) milk level at 4 days postpartum.[2]

Infant Levels. A mother was taking perampanel 8 mg daily as well as lacosamide 200 mg twice daily and brivaracetam 100 mg twice daily. Her infant was exclusively breastfed and had serum perampanel concentration of 0.23 micromoles/L (80 mcg/L) on day 1, 0.49 micromoles/L (171 mcg/L) on day 5, and 0.23 micromoles/L (80 mg/L) in week 5 postpartum, which are near the lower end of the therapeutic range of 0.25 micromoles/L. At week 11 postpartum, the infant was partially breastfed and perampanel was undetectable (<0.15 micromoles/L; <52 mcg/L) in the infant’s serum.[1]

One breastfeeding mother taking perampanel 4 mg daily plus lamotrigine had perampanel measured in the serum of her and her infant. Her infant had a serum level of 0.16 mg/L at 4 days postpartum, and an infant-to-maternal serum concentration ratio of 0.36 at 4 days postpartum.[2]

### Effects in Breastfed Infants

An infant was exclusively breastfed by a mother taking perampanel, brivaracetam and lacosamide for 6 weeks, then partially breastfed. The infant did not exhibit reduced wakefulness or feeding problems. At one year of age, the mother reported normal development.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Lamotrigine, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Landmark CJ, Rektorli L, Burns ML, et al. Pharmacokinetic data on brivaracetam, lacosamide and perampanel during pregnancy and lactation. Epileptic Disord 2021;23:426-31.33935028
2 Kacirova I, Urinovska R, Grundmann M. Therapeutic monitoring of lacosamide, perampanel, and zonisamide during breastfeeding. Epilepsy Res 2023;199:107264.38041996

## Substance Identification

### Substance Name

Perampanel

### CAS Registry Number

380917-97-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants